# Palonosetron

CASRN: 135729-61-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of palonosetron during breastfeeding. Until more data become available, palonosetron should be used with caution during breastfeeding. An alternate drug may be preferred.

No information is available on the use of netupitant, which is the other component of the combination product Akynzeo, during breastfeeding. Because netupitant and its metabolites are more than 97% bound to plasma proteins, the amount in milk is likely to be low. Until more data become available, Akynzeo should be used with caution during breastfeeding. An alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ondansetron

## Substance Identification

### Substance Name

Palonosetron

### CAS Registry Number

135729-61-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Gastrointestinal Agents

Serotonin Antagonists

Serotonin 5-HT3 Receptor Antagonists

Neurokinin-1 Receptor Antagonists